# Baxdrostat

CASRN: 1428652-17-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of baxdrostat during breastfeeding. Because baxdrostat is 74% bound to plasma proteins, the amount in milk is likely to be low. If a mother requires baxdrostat, it is not a reason to discontinue breastfeeding. Until more data become available, baxdrostat should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Baxdrostat

### CAS Registry Number

1428652-17-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents